# Levalbuterol

CASRN: 34391-04-3

## Drug Levels and Effects

### Summary of Use during Lactation

Levalbuterol is the R-enantiomer of the beta-2 adrenergic agonist, albuterol (salbutamol). Although no published data exist on the use of levalbuterol by mouth or inhaler during lactation, data from the related drug, terbutaline, indicate that very little is expected to be excreted into breastmilk.[1] The authors of several reviews and expert guidelines agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[2-5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Terbutaline

### References

1 Lindberg C, Boréus LO, de Château P, et al. Transfer of terbutaline into breast milk. Eur J Respir Dis Suppl 1984;134:87-91 6586490
2 McDonald CF, Burdon JGW. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8 8937369
3 Nelson-Piercy C. Asthma in pregnancy. Thorax 2001;56:325-8 11254828
4 National Heart, Lung, and Blood, Institute, et al. NAEPP expert panel report. Managing asthma during pregnancy: recommendations for pharmacologic treatment-2004 update. J Allergy Clin Immunol 2005;115:34-46
5 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758

## Substance Identification

### Substance Name

Levalbuterol

### CAS Registry Number

34391-04-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Bronchodilator Agents

Beta Adrenergic Agonists